# Pentobarbital

CASRN: 76-74-4

## Drug Levels and Effects

### Summary of Use during Lactation

Because there is little published experience with pentobarbital during breastfeeding, other agents may be preferred, especially while nursing a newborn or preterm infant. If pentobarbital is used, monitor the infant for sedation, poor feeding and poor weight gain.

### Drug Levels

Maternal Levels. A mother who was 4 days postpartum had taken pentobarbital 100 mg daily for 3 days. A milk level of 170 mcg/L was measured 19 hours after the previous dose.[1]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Zaleplon, Zolpidem

### References

1 Horning MG, Stillwell WG, Nowlin J, et al. (1975). Identification and quantification of drugs and drug metabolites in human breast milk using GC-MS-COM methods. Mod Probl Paediatr.

## Substance Identification

### Substance Name

Pentobarbital

### CAS Registry Number

76-74-4

### Drug Class

Breast Feeding

Lactation

Milk, Human

Barbiturates

Hypnotics and Sedatives

GABA Modulators